# Estradiol Valerate

CASRN: 979-32-8

## Drug Levels and Effects

### Summary of Use during Lactation

Estradiol valerate has not been studied during breastfeeding. Injectable estradiol valerate has been used to suppress lactation. Estradiol valerate should be avoided in mothers wishing to breastfeed, especially if it is started before the milk supply is well established at about 6 weeks postpartum. The decrease in milk supply can happen over the first few days of estrogen exposure.[1]

Oral estradiol valerate is only available in the United States in a combination oral contraceptive product that also contains dienogest. Based on the available evidence, expert opinion holds that nonhormonal methods are preferred during breastfeeding and progestin-only contraceptives are preferred over combined oral contraceptives in breastfeeding women, especially during the first 4 weeks postpartum. For further information, consult the record entitled, Contraceptives, Oral, Combined.

### Drug Levels

Maternal Levels. Relevant published information on estradiol valerate was not found as of the revision date. However, estradiol appears in breastmilk in small amounts after administration by other routes.[2,3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A telephone follow-up of 16 women taking short-term high dose estradiol valerate found no adverse effects on appetite or growth in their breastfed infants at a median follow-up age of 13 months. The median age of the infant at the start of therapy was 2 months (range 1.5 to 4 months) and the median daily dose was 2 mg (range 1 to 4 mg).[4]

### Effects on Lactation and Breastmilk

Estradiol valerate injection was previously used therapeutically to suppress lactation, usually in combination with testosterone.[5-7]

A retrospective cohort study compared 371 women who received high-dose estrogen (either 3 mg of diethylstilbestrol or 150 mcg of ethinyl estradiol daily) during adolescence for adult height reduction to 409 women who did not receive estrogen. No difference in breastfeeding duration was found between the two groups, indicating that high-dose estrogen during adolescence has no effect on later breastfeeding.[8]

Eight women taking estradiol valerate or estradiol hemihydrate in a median daily dose of 2 mg (range 1 to 4 mg) were followed up by telephone. The median time postpartum at the start of therapy was 2 months (range 1.5 to 4 months). The mean breastfeeding duration was 8.5 months. However, 8 of the women experienced a decrease in milk supply and 3 required supplementation with milk production not returning in these three.[4]

### Alternate Drugs to Consider

Ethinyl Estradiol

### References

1 Moses-Kolko EL, Berga SL, Kalro B, et al. Transdermal estradiol for postpartum depression: A promising treatment option. Clin Obstet Gynecol 2009;52:516-29 19661765
2 Nilsson S, Nygren KG, Johansson ED. Transfer of estradiol to human milk. Am J Obstet Gynecol 1978;132:653-7 717472
3 Perheentupa A, Critchley HO, Illingworth PJ, et al. Enhanced sensitivity to steroid-negative feedback during breast-feeding: Low-dose estradiol (transdermal estradiol supplementation) suppresses gonadotropins and ovarian activity assessed by inhibin B. J Clin Endocrinol Metab 2000;85:4280-6 11095468
4 Shalit S, Yehuda S, De-Haan T, et al. High dose estrogen during breastfeeding-a prospective study. Neurotoxicol Teratol 2025;109 (Suppl 2):25-6.doi:10.1016/j.ntt.2025.107515
5 Morris JA, Creasy RK, Hohe PT. Inhibition of puerperal lactation. Double-blind comparison of chlorotrianesene, testosterone enanthate with estradiol valerate and placebo. Obstet Gynecol 1970;36:107-14 4912251
6 Louviere RL, Upton RT. Evaluation of Deladumone OB in the suppression of postpartum lactation. Am J Obstet Gynecol 1975;121:641-2 1090174
7 Iliya FA, Safon L, O'Leary JA. Testosterone enanthate (180 mg.) and estradiol valerate (8 mg.) for suppression of lactation: A double-blind evaluation. Obstet Gynecol 1966;27:643-5 5949195
8 Jordan HL, Bruinsma FJ, Thomson RJ, et al. Adolescent exposure to high-dose estrogen and subsequent effects on lactation. Reprod Toxicol 2007;24:397-402 17531440

## Substance Identification

### Substance Name

Estradiol Valerate

### CAS Registry Number

979-32-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Estrogens

Hormones